# Evolocumab

CASRN: 1256937-27-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of evolocumab during breastfeeding. Because evolocumab is a large protein molecule with a molecular weight of 144,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, evolocumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808

## Substance Identification

### Substance Name

Evolocumab

### CAS Registry Number

1256937-27-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Anticholesteremic Agents

Hypolipidemic Agents